# Mirabegron

CASRN: 223673-61-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mirabegron during breastfeeding. Because of moderately high protein binding and only relatively low bioavailability, exposure of the breastfed infant is likely to be low. If mirabegron is required by the mother, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mirabegron

### CAS Registry Number

223673-61-8

### Drug Class

Breast Feeding

Lactation